# Omeprazole

CASRN: 73590-58-6

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal omeprazole doses of 20 mg daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. A woman taking oral omeprazole 20 mg daily for gastroesophageal reflux had omeprazole measured in her milk 3 weeks postpartum. The milk omeprazole level was not detectable for 90 minutes after the dose and then reached a peak of 20 mcg/L at 3 hours after the dose.[1] Using the peak milk level in this patient, the maximum dose that an exclusively breastfed infant would receive in breastmilk would be 3 mcg/kg daily or about 0.9% of the maternal weight-adjusted dosage. For comparison, doses of 1 mg/kg daily have been used in neonates.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One mother taking oral omeprazole 20 mg daily pumped and discarded her milk once each day 4 hours after her morning dose. She breastfed her infant the remainder of the day for 3 months before weaning. The infant remained well at 12 months of age.[1]

### Effects on Lactation and Breastmilk

The Spanish pharmacovigilance system found 20 cases of gynecomastia reported in patients taking omeprazole during the time period of 1982 to 2006.[2] A retrospective claims database study in the United States found that users of proton pump inhibitors had an increased risk of gynecomastia.[3] A review article reported that a search of database from the European Pharmacovigilance Centre found 104 cases of gynecomastia, 15 cases of galactorrhea, 15 cases of breast pain and 16 cases of breast enlargement associated with omeprazole. A search of the WHO global pharmacovigilance database found 439 cases of gynecomastia, 46 cases of galactorrhea, 93 cases of breast pain and 63 cases of breast enlargement associated with omeprazole.[4]

A 13-year-old girl was placed on omeprazole 20 mg twice daily by mouth for dyspepsia caused by mefenamic acid and a Helicobacter pylori infection. After 2 days of therapy, she developed bilateral galactorrhea and elevated serum prolactin. Three weeks after discontinuing omeprazole, galactorrhea and hyperprolactinemia resolved. Six weeks later, she was rechallenged with omeprazole and her serum prolactin rose from 27 to 70 mcg/L. Prolactin returned to normal 2 weeks after omeprazole discontinuation. Over the next 6 months, she was given domperidone on one occasion and lansoprazole on another. With both drugs, she developed galactorrhea and hyperprolactinemia which returned to normal after drug discontinuation.[5] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

A 26-year-old woman with a kidney transplant developed galactorrhea after her kidney function decreased. She was taking tacrolimus, prednisone, amlodipine, labetalol, lovastatin, nortriptyline and pyridoxine as well as omeprazole for heartburn. Her omeprazole dose had been increased from 20 mg twice a day to 40 mg twice a day 3 months prior. A week earlier, she had been given prescriptions for naratriptan for migraine and metoclopramide for nausea at an emergency department visit. Her symptoms persisted 4 weeks later and her serum prolactin was elevated. Metoclopramide was discontinued with no improvement change in serum prolactin. Omeprazole was discontinued and calcium carbonate started. Two weeks later, her serum prolactin had normalized. Two months later, her heartburn increased and omeprazole was restarted at 20 mg daily with no increase in serum prolactin.[6] The patient’s hyperprolactinemia and galactorrhea were probably caused by omeprazole.

A 26-year-old Bhutanese woman with a kidney transplant was maintained on tacrolimus 2 mg twice daily, prednisolone 5 mg once daily, leflunomide 20 mg once daily, nifedipine 40 mg twice daily, and hydralazine 50 mg three times daily. She came to the emergency room with a complaint of abdominal pain. Her tacrolimus dose was adjusted, and oral omeprazole was begun. After 3 days, she experienced milk production from her left breast. According to the patient she had experienced the same reaction 7 years prior when she had her kidney transplant. Omeprazole was stopped and milk production ceased 3 days later. The authors rated the galactorrhea as definitely being caused by omeprazole.[7]

### Alternate Drugs to Consider

Antacids, Cimetidine, Famotidine, Pantoprazole, Sucralfate

### References

1 Marshall JK, Thompson AB, Armstrong D. (1998). Omeprazole for refractory gastroesophageal reflux disease during pregnancy and lactation. Can J Gastroenterol.
2 Carvajal A, Macias D, Gutierrez A, et al. (2007). Gynaecomastia associated with proton pump inhibitors: A case series from the Spanish Pharmacovigilance System. Drug Saf.
3 He B, Carleton B, Etminan M. (2019). Risk of gynecomastia with users of proton pump inhibitors. Pharmacotherapy.
4 Ashfaq M, Haroon MZ, Alkahraman YM. (2022). Proton pump inhibitors therapy and risk of hyperprolactinemia with associated sexual disorders. Endocr Regul.
5 Jabbar A, Khan R, Farrukh SN. (2010). Hyperprolactinaemia induced by proton pump inhibitor. J Pak Med Assoc.
6 Prikis M, MacDougall J, Narasimhadevara N. (2020). Proton pump inhibitor-induced galactorrhea in a kidney transplant recipient: A friend or foe?. Case Rep Transplant.
7 Dorji C, Robin FA, Na-Bangchang K. (2022). Omeprazole-induced galactorrhea in kidney transplant patients-a case report. J Med Case Rep.

## Substance Identification

### Substance Name

Omeprazole

### CAS Registry Number

73590-58-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Ulcer Agents

Gastrointestinal Agents

Proton Pump Inhibitors